# Yttrium Y 90

CASRN: 10098-91-6

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of yttrium Y-90 microspheres as therapeutic agents. No information is available on the use of yttrium Y-90 microspheres during breastfeeding. However, little (with resin) or no (with glass) yttrium Y-90 attached to microspheres is available to the systemic circulation of the mother after administration via the hepatic artery, and doses less than 17 GBq do not appear to require withholding of breastfeeding.[1] In a study in which external radiation was measured after 143 administrations (124 resin, 19 glass) to 86 patients, only one exceeded the threshold for concern with close infant contact, using conservative methods.[2]

A dose of 185 MBq of yttrium Y-90 citrate injected into the knee for radiosynoviorthesis resulted in high levels of radioactivity in the milk for at least 26 days. The authors recommended cessation of breastfeeding for at least 1 month, which would usually preclude further nursing of the current infant.[3]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[4]

### Drug Levels

Yttrium-90 decays by emission of beta particles, with a physical half-life of 64.1 hours and a decay energy of 2.28 MeV.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Gulec SA, Siegel JA. (2007). Posttherapy radiation safety considerations in radiomicrosphere treatment with 90Y-microspheres. J Nucl Med.
2 McCann JW, Larkin AM, Martino LJ, et al. (2012). Radiation emission from patients treated with selective hepatic radioembolization using yttrium-90 microspheres: Are contact restrictions necessary?. J Vasc Interv Radiol.
3 Pigrée G, Césini J, Cruet-Hennequart S, et al. (2019). Transfer of yttrium-90 to breast milk during radiosynoviorthesis of the knee joint. Eur J Nucl Med Mol Imaging.
4 Stabin MG, Breitz HB. (2000). Breast milk excretion of radiopharmaceuticals: mechanisms, findings, and radiation dosimetry. J Nucl Med.

## Substance Identification

### Substance Name

Yttrium Y 90

### CAS Registry Number

10098-91-6

### Drug Class

Breast Feeding

Lactation

Radiopharmaceuticals

Yttrium Radioisotopes